# Oxytocin

CASRN: 50-56-6

## Drug Levels and Effects

### Summary of Use during Lactation

Oxytocin is an essential lactation hormone released during breastfeeding that causes milk ejection and appears to have calming effect on the mother.[1] Administration of exogenous oxytocin to mothers having difficulty in breastfeeding has not been clearly shown to have a beneficial effect on lactation success or in the treatment of breast engorgement. It might be of benefit with spinal cord injury where the neuronal connection between the breast and hypothalamus have been lost or with rare endocrine disorders such as panhypopituitarism. Effects on the infant are unlikely when oxytocin is given during breastfeeding.

Some studies suggest that oxytocin given during labor can negatively affect breastfeeding, possibly by reducing sucking behavior in the newborn in a dose-dependent manner, or by decreasing postpartum oxytocin release although study timing of oxytocin administration and study methodology has varied considerably.[2-21] However, another study found no relationship between cumulative oxytocin dosage and breastfeeding success at 1 week postpartum.[18] Induction of labor in the late preterm period of 34 weeks 0 days to 36 weeks 6 days appears to not have an effect on the breastfeeding rate.[22] The effect on breastfeeding might be most important during the initiation of breastfeeding, but may not persist after lactation is established.[23,24] Two studies found that only oxytocin in conjunction with epidural analgesia reduced breastfeeding, but not oxytocin alone.[16,25] Another study found that all rhythmic reflexes, the antigravity reflex, and total primitive neonatal reflexes were inhibited by intrapartum oxytocin administration, unrelated to dose, which could adversely affect breastfeeding.[26] Another small study found that exogenous oxytocin for induction or augmentation of labor was positively associated with higher quality of observed mother-infant bonding,[27] while another study did not find any association with bonding or maternal breastfeeding attitude.[28] Some evidence exists that peripartum oxytocin administration might increase the risk of postpartum depression.[15]

### Drug Levels

Maternal Levels. Sixty-two nursing mothers who were 3 to 9 months postpartum, 26 with probable postnatal depression and 36 unlikely to have postnatal depression, had oxytocin measured in breastmilk at baseline and after administration of 12 IU (26.9 mcg) of intranasal oxytocin spray (Syntocinon) or placebo into each nostril in a randomized, double-blind fashion. Milk samples of 5 mL were collected during nursing and 30 to 45 minutes after administration of the nasal spray. Mothers with postnatal depression had baseline oxytocin milk levels of 227 picograms/5 mL and those without had an average of 209 picogram/5 mL, but the difference was not statistically significant. After the placebo nasal spray, there was no change in milk oxytocin levels in either group. After receiving the oxytocin nasal spray, milk oxytocin levels averaged about 700 picogram/5 mL in the non-depression group, but only about 300 picogram/5 mL in the postnatal depression group.[29]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Nasal spray. Intranasal oxytocin is reportedly used by some midwives as a galactogogue.[30] It has also been used as part of regimens used by adoptive mothers who wish to breastfeed.[31]

A small study found no difference in symptoms between subcutaneous oxytocin 2.5 international units daily and placebo after 3 days of treatment for breast engorgement.[32,33]

An early randomized, placebo-controlled trial used oxytocin nasal spray in the mothers of newborns, but lactation management fell far short of what is considered acceptable nowadays. The study found that the spray might be useful in decreasing breast engorgement slightly in the mothers of full-term infants, but no difference was found in the average infant weight loss between birth and day 4 in the oxytocin and placebo groups.[34]

Two similarly designed trials studied oxytocin nasal spray in mothers of preterm newborns who were pumping milk for their infants. The first studied mothers of infants born before 38 weeks and used a total of 3 units of intranasal oxytocin (Syntocinon-Sandoz, 40 units/mL) before pumping each breast for 10 minutes four times daily. Among primiparous mothers, milk production during days 2 to 5 days postpartum was 1964 mL in those who used oxytocin and 510 mL in those who received placebo spray. Because of the large and statistically significant effect of oxytocin among primiparous women, the trial was stopped after only 8 primiparous mothers had been studied. No statistically significant difference was found between oxytocin and placebo among 4 multiparous women who were attempting to breastfeed for the first time. The paper did not report giving the mothers any instructions in lactation technique.[35]

Fifty-one mothers who delivered an infant of less than 35 weeks gestation were studied. Twenty-seven mothers used 4 units of intranasal oxytocin (Syntocinon-Novartis, 40 units/mL), and 24 mothers received an identical placebo spray before pumping with a breast pump. All mothers were given instructions on using hand massage before pumping and advised pumping every 3 hours. No difference in milk production over the first 5 days postpartum was found between mothers who received oxytocin (median 667 mL) and placebo (median 530 mL), although women receiving oxytocin produced slightly more milk on day 2 of the study. Parity had no effect in this study.[36]

Several factors might explain the differences in findings between the studies. Because of the great interpatient variability in milk production documented in the recent study and the small number of patients in the first study, the finding in the earlier study may have been due to chance. A 50% higher dose of oxytocin was used in the first study, which may have had a greater effect. Another plausible explanation is the good lactation support given to mothers in the recent larger study that seemed to be lacking in the early study.

Two case reports indicate that oxytocin nasal spray may facilitate letdown in tetraplegic women who have lost the neuronal connection between the nipple and the hypothalamus.[37]

A woman diagnosed with panhypopituitarism became pregnant and wished to breastfeed. On the second day postpartum, she began using 2 IU of oxytocin (Grindex, Australia) by nasal spray before each breastfeeding session. Initially, the use of intranasal oxytocin before every session of breastfeeding facilitated milk ejection, particularly in the early weeks postpartum. After one month, there was no observable difference that could be attributed to oxytocin administration, and breastmilk continued to flow by hand expression without it. At that point he mother decided to discontinue oxytocin. However, the milk volume was not sufficient for exclusive breastfeeding, even with the use of domperidone, goats’ rue, torbangun, and fenugreek, so her baby received supplementary infant formula.[38]

A placebo-controlled 8-week study of 24 IU of oxytocin nasal spray four times daily compared serum sex hormone levels in nonlactating men and women. The study found that oxytocin had no effect on serum prolactin, testosterone or estradiol.[39]

During labor. A study of mothers who received oxytocin during labor found that on the second day postpartum, oxytocin infusion decreased endogenous oxytocin levels dose-dependently. Epidural analgesia in combination with oxytocin infusion influenced endogenous oxytocin levels negatively. Oxytocin infusion also increased serum prolactin.[14]

Logistic regression of data from 585 mothers who had epidural analgesia during labor found that mothers who had received exogenous oxytocin had a 3.3 times greater risk of delayed onset of lactation than women who did not.[4]

An observational study of 20 primiparous women found that those who were exclusively breastfeeding at 3 months (63%) had received a lower dose of oxytocin during labor (mean total dosage 1363 milliunits) than those who were not exclusively breastfeeding (mean total dosage 3088 milliunits). This result was attributed to an inhibitory effect on neonatal sucking by the infant caused by oxytocin.[5]

A small, nonrandomized cohort study found that the newborn infants whose mothers received synthetic oxytocin to induce or maintain labor had a decreased level of prefeeding organization one hour after birth.[6]

A retrospective cohort study in Spain compared breastfeeding outcomes between mothers who received oxytocin during labor (n = 189) and mothers who did not, including those who delivered via elective Cesarean section (n = 127). Mothers who received oxytocin during the first and second stages of labor had a 45% increased risk of bottle feeding and a 129% increased risk of breastfeeding discontinuation by 3 months of age. Effects were most pronounced in women under 27 years of age.[8]

A small prospective study in California compared women who received an epidural infusion of fentanyl and ropivacaine to mothers who did not receive an epidermal during labor. All mothers had normal vaginal deliveries, and their infants had 1 uninterrupted hour of skin-to-skin contact immediately postpartum. The study found inverse relationships between the amount of fentanyl and the amount of oxytocin received during labor and the time of the first suckling. Because women who received more fentanyl also tended to receive more oxytocin, the study could not clearly separate the effects of the two drugs.[9]

A small prospective cohort study in Spain followed mothers by telephone postpartum to determine their breastfeeding status. Mothers who had received oxytocin during labor were breastfeeding at a similar rate as those who had not at 1, 3 and 6 months postpartum.[40]

A nonblinded, nonrandomized study compared breastfeeding among the infants of mothers who received oxytocin during delivery (n = 70) and those who did not (n = 90) in two Iranian hospitals. Mothers were primiparous and infants were full term. Infant breastfeeding behavior was assessed to be either successful or unsuccessful within 2 hours of delivery. Infants whose mothers received oxytocin were judged to successfully breastfeed 48.6% compared to 82.2% among the infants of mothers who did not receive oxytocin. Use of opiate pain relievers in the two groups was not stated.[41]

A retrospective cohort study compared breastfeeding results between women who did and did not receive oxytocin during labor. After correcting for confounding factors, the study found that exogenous oxytocin impaired breastfeeding during the first hour postpartum, but not at 3 months postpartum. High pregestational body mass index was the best predictor of an impaired third month’s postpartum breastfeeding.[12]

A retrospective case-control study conducted in two hospitals in central Iran compared breastfeeding behaviors in the first 2 hours postdelivery by infants of 4 groups of primiparous women with healthy, full-term singleton births who had vaginal deliveries. The groups were those who received no medications during labor, those who received oxytocin plus scopolamine, those who received oxytocin plus meperidine, and those who received oxytocin, scopolamine and meperidine. The infants in the no medication group performed better than those in all other groups, and the oxytocin plus scopolamine group performed better than the groups that had received meperidine.[13]

A prospective cohort study in Spain found no relationship between oxytocin dose during labor or postpartum with the duration of breastfeeding. However, elective cesarean section without oxytocin resulted in the greatest risk of stopping exclusive breastfeeding.[42]

An observational study in Sweden compared nursing behaviors of the infants of mothers who received intravenous oxytocin or intramuscular oxytocin with or without receiving epidural analgesia with sufentanil and bupivacaine. Infants of mothers who received oxytocin infusions alone during labor breastfed as well as those of mothers who had no interventions during labor. Mothers who received oxytocin plus epidural analgesia had reduced breastfeeding behaviors and more weight loss at 2 days postpartum than those who did not receive epidural analgesia. The mothers of infants who breastfed well had greater variability in serum oxytocin than those whose infants did not breastfeed well.[25]

A study examined the effects of low, medium and high doses of intrapartum synthetic oxytocin administered to mothers who received no oxytocin. A dose-related decrease in several infant breastfeeding behaviors and the number of exclusive nursing bouts at 24, 48 and 72 hours was found, but there was no difference in the rate of exclusive breastfeeding at 3 months postpartum.[24]

In a study of primiparous women with an uncomplicated pregnancy, women were given oxytocin 1 to 2 milliunits/min initially, with dosage increases of 1 to 2 milliunits/min every 30 minutes until effective contractions were achieved, up to a maximum of 20 milliunits/min. Some women received epidural analgesia with ropivacaine and fentanyl, some received oxytocin alone and other received neither. Breastfeeding outcomes in the three groups were compared at 3 days, 1 month and 4 months postpartum. The study found no relationship between this low-dose oxytocin use and breastfeeding success, but that epidermal analgesia reduced maternal salivary oxytocin levels, lowered milk supply at 3 days and 1 month postpartum, and decreased rates of breastfeeding at 4 months postpartum.[16]

A case-control study in a hospital in Istanbul, Türkiye compared 44 women who received oxytocin for induction of labor to 44 women who did not. There was no significant difference between the mean scores of the Breastfeeding Self-Efficacy Scale and the LATCH scores between the two groups.[17]

A multicenter study in Sweden compared breastfeeding outcomes of 1395 women who received oxytocin during labor. After adjusting for confounding variables (maternal age, early pregnancy BMI, epidural analgesia, and infant weight >4 kg), no difference was found in the breastfeeding rates at 1 week postpartum over the range of cumulative oxytocin dosages that the mothers received.[18]

The sucking ability of 29 vaginally delivered infants whose mothers received oxytocin during delivery were compared to 35 infants whose mothers received no oxytocin. The average maternal oxytocin dose was 3.45 IU over an average of 354 minutes. The infants in the oxytocin group had fewer sucking bursts, longer times between bursts and more variability in sucking than those not exposed. At 1 month postpartum, infants exposed to oxytocin were less likely to be exclusively breastfed than those not exposed (17% vs 43%). The authors concluded that infant sucking ability was impaired for up to 48 hours after maternal oxytocin infusion during labor.[43]

Maternal and neonatal salivary oxytocin levels were measured before and after breastfeeding at 24 to 48 h postpartum in women who did (n = 23) or did not (n = 26) receive oxytocin during labor. Neonatal sucking ability was assessed after 5 min of non-nutritive sucking, and breastfeeding practices were evaluated at 72 hours and 1 month postpartum. Intrapartum oxytocin did not significantly affect maternal oxytocin but was associated with reduced neonatal salivary oxytocin and weaker sucking patterns, suggesting that exogenous oxytocin during labor interferes with neonatal oxytocin regulation and early feeding.[21]

A subanalysis of a large multicenter study (n = 2,130) of women who delivered between 34 weeks 0 days and 36 weeks 6 days found that there was no difference in breastfeeding rates among the infants of women who received labor induction and those who did not.[22]

### References

1 Niwayama R, Nishitani S, Takamura T, . Oxytocin mediates a calming effect on postpartum mood in primiparous mothers. Breastfeed Med 2017;12:103-9.28103103
2 Jonas W, Nissen E, Ransjö-Arvidson AB, . Influence of oxytocin or epidural analgesia on personality profile in breastfeeding women: a comparative study. Arch Womens Ment Health 2008;11:335-45.18726143
3 Jordan S, Emery S, Watkins A, . Associations of drugs routinely given in labour with breastfeeding at 48 hours: Analysis of the Cardiff births survey. BJOG 2009;116:1622-9.19735379
4 Wiklund I, Norman M, Uvnäs-Moberg K, . Epidural analgesia: breast-feeding success and related factors. Midwifery 2009;25:e31-8.17980469
5 Olza Fernández I, Marin Gabriel M, Malalana Martínez A, . Newborn feeding behaviour depressed by intrapartum oxytocin: A pilot study. Acta Paediatr 2012;101:749-54.22452314
6 Bell AF, White-Traut R, Rankin K. Fetal exposure to synthetic oxytocin and the relationship with prefeeding cues within one hour postbirth. Early Hum Dev 2013;89:137-43.23084698
7 Davey MA, Gibson KL. Intervention in labour and early breastfeeding outcomes. Arch Dis Child Fetal Neonatal Ed 2014;99:A81. doi:10.1136/archdischild-2014-306576.231
8 García-Fortea P, González-Mesa E, Blasco M, . Oxytocin administered during labor and breast-feeding: A retrospective cohort study. J Matern Fetal Neonatal Med 2014;27:1598-603.24289796
9 Brimdyr K, Cadwell K, Widstrom AM, . The association between common labor drugs and suckling when skin-to-skin during the first hour after birth. Birth 2015;42:319-28.26463582
10 Gu V, Feeley N, Gold I, . Intrapartum synthetic oxytocin and its effects on maternal well-being at 2 months postpartum. Birth 2016;43:28-35.26554749
11 Erickson EN, Emeis CL. Breastfeeding outcomes after oxytocin use during childbirth: An integrative review. J Midwifery Womens Health 2017;62:397-417.28759177
12 Gomes M, Trocado V, Carlos-Alves M, . Intrapartum synthetic oxytocin and breastfeeding: A retrospective cohort study. J Obstet Gynaecol 2018;38:745-9.29523035
13 Hemati Z, Abdollahi M, Broumand S, . Association between newborns’ breastfeeding behaviors in the first two hours after birth and drugs used for their mothers in labor. Iran J Child Neurol 2018;12:33-40.29696044
14 Jonas W, Johansson LM, Nissen E, . Effects of intrapartum oxytocin administration and epidural analgesia on the concentration of plasma oxytocin and prolactin, in response to suckling during the second day postpartum. Breastfeed Med 2009;4:71-82.19210132
15 Monks DT, Palanisamy A. Oxytocin: At birth and beyond. A systematic review of the long-term effects of peripartum oxytocin. Anaesthesia 2021;76:1526-37.34389972
16 Takahata K, Horiuchi S, Miyauchi A, . A longitudinal study of the association of epidural anesthesia and low-dose synthetic oxytocin regimens with breast milk supply and breastfeeding rates. Sci Rep 2023;13:21146.38036700
17 Kartal YA, Kaya L, Yazıcı S. Effects of oxytocin induction on early postpartum hemorrhage, perineal integrity, and breastfeeding: A case-control study. Rev Assoc Med Bras (1992) 2023;70:e20231002.
18 Brüggemann C, Carlhäll S, Grundström H, . Cumulative oxytocin dose in spontaneous labour - Adverse postpartum outcomes, childbirth experience, and breastfeeding. Eur J Obstet Gynecol Reprod Biol 2024;295:98-103.38350309
19 Hulman A, Pakai A, Csákvári T, . Impact of different obstetric interventions and types of delivery on breastfeeding: A nationwide cross-sectional survey of Hungarian women. BMC Pregnancy Childbirth 2024;24:473.38992633
20 Ayuby NA, Ang MQ, Sultana R, . Investigating the association between labor pain and cessation of breastfeeding. Sci Rep 2024;14:31361.39732915
21 Omaru M, Fujita F, Kajiwara S, . Associations of intrapartum synthetic oxytocin administration with reduced neonatal salivary oxytocin levels and altered sucking patterns. Early Hum Dev 2026;218:106539.41844439
22 Sutton A, Rogerson D, Thomson S, . Induction of labor is not associated with decreased rates of breastfeeding in late preterm pregnancies. AJOG Glob Rep 2026;6:100637.42088726
23 Takács L, Bartoš F, Čepický P, . The effects of intrapartum administration of synthetic oxytocin on breastfeeding in the first 9 months postpartum: A longitudinal prospective study. Breastfeed Med 2021;16:965-70.34463162
24 Zhou Y, Liu W, Xu Y, . Effects of different doses of synthetic oxytocin on neonatal instinctive behaviors and breastfeeding. Sci Rep 2022;12:16434.36180494
25 Takahashi Y, Uvnäs-Moberg K, Nissen E, . Epidural analgesia with or without oxytocin, but not oxytocin alone, administered during birth disturbs infant pre-feeding and sucking behaviors and maternal oxytocin levels in connection with a breastfeed two days later. Front Neurosci 2021;15:673184.34267623
26 Marín Gabriel MA, Olza Fernández I, Malalana Martínez AM, . Intrapartum synthetic oxytocin reduce the expression of primitive reflexes associated with breastfeeding. Breastfeed Med 2015;10:209-13.25785487
27 Edwards H, Buisman-Pijlman FT, Esterman A, . Exogenous oxytocin administered to induce or augment labour is positively associated with quality of observed mother-infant bonding. Compr Psychoneuroendocrinol 2024;20:100262.39296881
28 Özdemir M, Çeber Turfan E, Keskin HL. Oxytocin administration during labor does not affect maternal serum oxytocin levels, early postpartum breastfeeding attitude and maternal attachment. PLoS One 2025;20:e0337762.41348825
29 Lindley Baron-Cohen K, Fearon P, Feldman R, . Intranasal oxytocin increases breast milk oxytocin, but has a reduced effect in depressed mothers: A randomized controlled trialcon. Psychoneuroendocrinology 2025;174:107374.39891981
30 Winterfeld U, Meyer Y, Panchaud A, . Management of deficient lactation in Switzerland and Canada: A survey of midwives’ current practices. Breastfeed Med 2012;7:317-8.22224508
31 Cazorla-Ortiz G, Obregón-Guitérrez N, Rozas-Garcia MR, . Methods and success factors of induced lactation: A scoping review. J Hum Lact 2020;36:739-49.32926655
32 Ingelman-Sundberg A. Early puerpereal breast engorgement. Acta Obstet Gynecol Scand 1953;32:399-402.13138066
33 Mangesi L, Zakarija-Grkovic I. Treatments for breast engorgement during lactation. Cochrane Database Syst Rev 2016;6:CD006946.
34 Luhman LA. The effect of intranasal oxytocin on lactation. Obstet Gynecol 1963;21:713-7.13931578
35 Ruis H, Rolland R, Doesburg W, . Oxytocin enhances onset of lactation among mothers delivering prematurely. Br Med J (Clin Res Ed) 1981;283:340-2.
36 Fewtrell MS, Loh K, Blake A, . Randomised, double-blind trial of oxytocin nasal spray in mothers expressing breast milk for preterm infants. Arch Dis Child Fetal Neonatal Ed 2006;91:F169-74.16223754
37 Cowley KC. Psychogenic and pharmacologic induction of the let-down reflex can facilitate breastfeeding by tetraplegic women: A report of 3 cases. Arch Phys Med Rehabil 2005;86:1261-4.15954070
38 Derdikman Ofir Y, Eglash A, Moberg KU, . Breastfeeding in panhypopituitarism: A case report, review of the literature, and management checklist. Int Breastfeed J 2026;30:923-33.
39 Galbiati F, Hiranandani S, Wronski ML, . Reproductive hormone stability with prolonged intranasal oxytocin in adults with obesity. Int J Obes (Lond) 2026;50:1508-14.41951782
40 Fernández-Cañadas Morillo A, Marin Gabriel MA, Olza Fernández I, . The relationship of the administration of intrapartum synthetic oxytocin and breastfeeding initiation and duration rates. Breastfeed Med 2017;12:98-102.28165755
41 Abdoulahi M, Hemati Z, Asl FS, . Association of using oxytocin during labor and breastfeeding behaviors of infants within two hours after birth. Iran J Neonatol 2017;8:48-52. doi:10.22038/ijn.2017.18301.1209
42 Fernández-Cañadas Morillo A, Duran Duque M, Hernandez López AB, . Cessation of breastfeeding in association with oxytocin administration and type of birth. A prospective cohort study. Women Birth 2019;32:e43-e8.29754970
43 Omaru M, Kajiwara S, Wakamatsu E, . Impact of intrapartum oxytocin administration on neonatal sucking behavior and breastfeeding. Sci Rep 2024;14:5859.38467725

## Substance Identification

### Substance Name

Oxytocin

### CAS Registry Number

50-56-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Oxytocics

Pituitary Hormones, Posterior